# Dicloxacillin

CASRN: 3116-76-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that dicloxacillin levels in milk are very low and are not expected to cause adverse effects in breastfed infants. It is frequently used to treat mastitis in nursing mothers.[1-3] Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Dicloxacillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a single oral dose of 250 mg of dicloxacillin in 2 women, milk samples were assayed using a bioassay. Milk levels ranged from 200 to 300 mcg/L between 2 and 4 hours after the dose. The drug was undetectable (lower limit of assay not stated) in milk at 1 and 6 hours after the dose.[4]

Three nursing mothers with mastitis were prescribed dicloxacillin 500 mg every 6 hours. They collected milk samples at 0, 1, 2, 3, 4, 5, and 6 hours after a dose on or after the fourth day of therapy by pumping both breasts and combining the resultant milk. Measurement with liquid chromatography mass spectrometry found that the average peak milk concentration was 67.6 mcg/L at 4 hours after the dose and the average concentration was 57.7 mcg/L. These values resulted in an average infant dosage of 8 mcg/kg daily, which is 0.03% of the maternal weight-adjusted dosage.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-sensitive Staph. aureus) Cefazolin, Cephalexin, Floxacillin, Oxacillin, Methicillin, Nafcillin; (Methicillin-resistant Staph. aureus) Doxycycline, Linezolid, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Berth WL, Schauberger CW, Alvarado MA, et al. Telephone-based management of lactation mastitis. J Reprod Med 2009;54:291-4.19517693
2 Amir LH. ABM clinical protocol #4: Mastitis, revised March 2014. Breastfeed Med 2014;9:239-43.24911394
3 Berens PD. Breast pain: Engorgement, nipple pain, and mastitis. Clin Obstet Gynecol 2015;58:902-14.26512442
4 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732
5 Muysson M, Datta P, Rewers-Felkins K, et al. Transfer of dicloxacillin into human milk. Breastfeed Med 2020;15:715-7.32678981

## Substance Identification

### Substance Name

Dicloxacillin

### CAS Registry Number

3116-76-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins